# Pomegranate

## Drug Levels and Effects

### Summary of Use during Lactation

Pomegranate juice contains ellagitannins and numerous polyphenols such as delphinidin, cyanidin, pelargonidin, punicalin, pedunculagin, punicalagin, gallagic, and ellagic acid as well as vitamin C and B vitamins. Administration of pomegranate juice to nursing mothers result in a change in the microbiota of breastmilk and infant stools and an increase in antioxidant content of breastmilk and infant urine. A low-quality study found that administration of pomegranate juice concentrate to nursing mothers of infants with hyperbilirubinemia hastened the infant’s improvement with phototherapy treatment. No adverse reactions to maternal pomegranate ingestion in breastfed infants have been observed.

### Drug Levels

Pomegranate juice contains ellagitannins that are metabolized to ellagic acid. Intestinal bacteria convert ellagic acid to urolithins that are absorbed by the mother and can appear in breastmilk.

Maternal Levels. Twelve exclusively breastfeeding mothers of full-term infants consumed 8 fluidounces of pomegranate juice daily for 2 weeks. After 2 weeks, breastmilk samples contained a median of 10.7 nmol/L of urolithin A-glucuronide. Two women had urolithin B-glucuronide in their milk in concentrations of 0.5 and 11.9 nmol/L. In addition, the microbiome of breastmilk was altered with a decrease in Lactococcus, Subdoligranulum, and Acinetobacter, and an increase in Firmicutes such as Faecalibacterium.[1]

Infant Levels. Twelve exclusively breastfeeding mothers of full-term infants consumed 8 fluidounces of pomegranate juice daily for 2 weeks. After 2 weeks, all of their exclusively breastfed infants’ urine samples contained urolithin A-glucuronide in a median concentration of 18.1 nmol/L. The urine of 2 infants whose mothers’ milk contained urolithin B-glucuronide contained it also in a median concentration of 1.8 nmol/L. Five other infants’ urine contained dimethyl ellagic acid glucuronide in concentration ranging from 0.8 to 17.5 nmol/L.[1]

### Effects in Breastfed Infants

Twelve exclusively breastfeeding mothers of full-term infants consumed 8 fluidounces of pomegranate juice daily for 2 weeks. After 2 weeks, the infant stool samples had significant increases in the abundance of bacteria from the phylum Firmicutes (genus Lachnoclostridium and Staphylococcus). Infants whose mothers’ milk contained urolithin B-glucuronide (metabotype B) showed significant differences in 4 bacteria, with 2 bacteria from the phyla Firmicutes (genus Veillonella) and Bacteroidetes (genus Bacteroides and Parabacteroides) and Bifidobacterium. Infant stool Blautia was positively corelated with breastmilk and plasma urolithin B-glucuronide and infant stool Enterococcus was inversely related to breastmilk maternal plasma urolithin B-glucuronide, and maternal plasma urolithin B-glucuronide and dimethyl ellagic acid glucuronide.[1]

An open-label, nonblinded study randomized mothers of newborn infants to receive either concentrated pomegranate juice 15 mL 3 times daily or nothing (i.e., no placebo control). There were 43 mother-infant pairs in each group. The concentrate was made from the juice of fresh pomegranates concentrated at a warm temperature to a Brix of 60%. The total phenol content was 13.56 mg/g and the total flavonoid was 1.39 mg/g. All of the infants were over 72 hours old, had a gestational age over 37 weeks and birth weight over 2500 grams. Both groups were being treated with phototherapy for hyperbilirubinemia (total serum bilirubin level over 15 mg/dL). There was a greater decrease in bilirubin levels in the pomegranate group at 48 and 72 hours after the start of phototherapy and at 48 hours after discharge. In addition, the mean duration of phototherapy in the pomegranate group was significantly shorter (52 hours compared to 65 hours) than in the no-pomegranate group. All infants in the pomegranate group were discharged by 96 hours after the start of treatment compared to 114 hours in the no-pomegranate group. No side effects were observed in the infants whose mothers received pomegranate juice concentrate.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Henning SM, Yang J, Lee RP, et al. Pomegranate juice alters the microbiota in breast milk and infant stool: A pilot study. Food Funct 2022;13:5680-9.35510588
2 Rezapour M, Zahedpasha Y, Kamalinejad M, et al. The effect of oral use of concentrated pomegranate juice by mothers on hyperbilirubinemia in neonates under phototherapy: A randomized clinical trial. J Res Med Sci 2023;28:46.37496646

## Substance Identification

### Substance Name

Pomegranate

### Scientific Name

Punica granatum

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal